# Mebufotenin

CASRN: 1019-45-0

## Drug Levels and Effects

### Summary of Use during Lactation

Mebufotenin is an investigational hallucinogenic drug being studied for postpartum depression. No information is available on the clinical use of mebufotenin during breastfeeding. However, amounts in breastmilk appear to be low after maternal inhalation and would not be expected to cause any adverse effects in breastfed infants after the first day of administration.

### Drug Levels

Maternal Levels. In a preliminary study on the use of mebufotenin for postpartum depression, patients were administered an individualized dosing regimen of up to three escalating doses of mebufotenin (6, 12, and 18 mg) on a single day by pulmonary inhalation. Of the four lactating patients, three received mebufotenin 6 + 12 mg and one received mebufotenin 6 + 12 + 18 mg. Concentrations of mebufotenin, its psychoactive metabolite bufotenin, and its non-psychoactive metabolite 5-methoxyindole- 3-acetic acid (5-MIAA) were measured in breastmilk. Mebufotenin levels in breastmilk ranged from 0.24 to 3.11 mcg/L at 1 hour post-dose, from below the limit of quantification (BLQ) to 0.56 mcg/L at 2.5 hours post-dose, and from BLQ to 0.04 mcg/L at about 8 hours after the dose; all levels were BLQ on days 2 and 8. Bufotenin was BLQ in breastmilk at all time points. 5-MIAA levels were 13.9 to 28.5 mcg/L at 1 hour post-dose, 8.1 to 13.5 mcg/L at 2.5 hours after the dose, BLQ to 0.90 mcg/L at about 8 hours after the dose, BLQ to 0.22 mcg/L on day 2, and BLQ on day 8.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Deligiannidis K. GH001 is associated with improved self-reported maternal functioning in patients with postpartum depression and rapid elimination from breastmilk. Neuropsychopharmacology 2026;51:65-6.doi:10.1038/s41386-025-02278-x

## Substance Identification

### Substance Name

Mebufotenin

### CAS Registry Number

1019-45-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hallucinogens

Serotonin Antagonists